# Breastfeeding Links and Resources

Academy of Breastfeeding Medicine (http://www.bfmed.org)

American Academy of Family Physicians, Breastfeeding Position Paper (http://www.aafp.org/online/en/home/policy/policies/b/breastfeedingpositionpaper.html)

American Academy of Pediatrics, Breastfeeding Resources for Mothers (http://www.healthychildren.org/English/ages-stages/baby/breastfeeding/Pages/default.aspx)

American Academy of Pediatrics, Resources for Health Professionals (https://www.aap.org/en-us/advocacy-and-policy/aap-health-initiatives/Breastfeeding/Pages/Resources-for-Health-Professionals.aspx)

International Lactation Consultant Association (http://www.ilca.org/home)

MotherToBaby, Breastfeeding Information Service (https://mothertobaby.org/)

LactRx App

United States Breastfeeding Committee (http://www.usbreastfeeding.org/)